# Alteplase

CASRN: 105857-23-6

## Drug Levels and Effects

### Summary of Use during Lactation

Tissue plasminogen activator (tPA), which is identical to alteplase, is a normal component of human colostrum and breastmilk.[1-3] Levels in milk are highest in colostrum and decrease rapidly during the first week, followed by a slower decrease over time.[2,3] Because alteplase is a large protein molecule with a molecular weight of about 59,000 Da, absorption is unlikely because it is probably partially destroyed in the infant's gastrointestinal tract and poorly absorbed orally. No information is available on the clinical use of alteplase during breastfeeding. Until more data become available, alteplase should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Heegaard C, Larsen L, Rasmussen L, et al. Plasminogen activation system in human milk. J Pediatr Gastroenterol Nutr 1997;25:159-66.9252902
2 Marshall J, Rees M, Cederholm-Williams S. Identification of t-PA as the major active plasminogen activator in human milk. Thromb Haemost 1986;55:279-81.3087004
3 Ishii A, Yamada S, Yamada R, et al. Determination of t-PA activity and t-PA antigen in human milk. J Perinat Med 1992;20:203-7.1453294

## Substance Identification

### Substance Name

Alteplase

### CAS Registry Number

105857-23-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Enzymes

Blood Coagulation Factors

Plasminogen Activators